# Cefepime

CASRN: 88040-23-7

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published information is available on the use of cefepime during breastfeeding, the levels in breastmilk appear to be low and cephalosporins are generally not expected to cause serious adverse effects in breastfed infants. No human information is available on zidebactam (a component of Zaynich) in breastmilk. Occasional disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, has been reported with beta-lactam antibiotics, but these effects have not been adequately evaluated. Cefepime is acceptable in nursing mothers. The combination of cefepime and zidebactam has not been studied in humans during breastfeeding, but the adverse effects are probably similar to those of cefepime.

### Drug Levels

Maternal Levels. The manufacturer reports that the mean concentration of cefepime in breastmilk in 9 healthy women was about 0.5 mcg/mL during the first 8 hours, following a single intravenous dose of 1 gram, then undetectable between 12 and 24 hours. The mean cumulative breast milk excretion of cefepime over 24 hours was 0.01% of the administered dose. A nursing infant consuming approximately 1000 mL of human milk per day would receive approximately 0.5 mg of cefepime per day. This is consistent with the low levels of other cephalosporins in breastmilk.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ceftazidime, Ceftriaxone

## Substance Identification

### Substance Name

Cefepime

### CAS Registry Number

88040-23-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins